# Etanercept

CASRN: 185243-69-0

## Drug Levels and Effects

### Summary of Use during Lactation

Etanercept is minimally excreted into breastmilk and poorly absorbed by the infant, which would be expected because of its high molecular weight of approximately 150,000 Da. Long-term follow-up data on infants breastfed during maternal etanercept use are not available. The risk of adverse effects in older infants is not known, but thought to be unlikely.[1] Numerous experts and professional guidelines have stated that the drug is a low risk to the nursing infant and acceptable to use during breastfeeding.[2-7] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[8] Anti-TNF agents appear to reduce the levels of tumor necrosis factor and IP-10 in the milk of mothers with inflammatory bowel disease in the early postpartum period.[9] This reduction in TNF might lead to decreased milk production, so extra lactation support might be necessary in women taking etanercept.

### Drug Levels

Maternal Levels. One woman was receiving etanercept 25 mg subcutaneous injections twice weekly. The mother was secreting small amounts of milk, but not breastfeeding. On day 44 after delivery the trough milk etanercept level before the fifth dose was 50 mcg/L. A milk etanercept level one day after the fifth injection was 75 mcg/L and milk levels declined thereafter.[1]

A woman received etanercept 25 mg subcutaneously twice weekly during pregnancy and lactation. At 12 weeks postpartum, a breastmilk sample taken at an unspecified time after a dose was 3.5 mcg/L. Her serum etanercept concentration at the same time was 2872 mcg/L.[10]

A woman with ankylosing spondylitis received etanercept 25 mg subcutaneously once weekly during pregnancy and postpartum. Breastmilk concentrations were measured daily from day 40 to day 47 postpartum following a dose on day 40. Breastmilk concentrations ranged from 2 to 5 mcg/L; the high concentration of 5 mcg/L occurred on day 43 and corresponded with the highest maternal serum etanercept concentration. By day 47, etanercept was not detectable in breastmilk (<2 mcg/L).[11]

A woman with rheumatoid arthritis began etanercept 25 mg subcutaneously twice a week at 3 months postpartum and later switched to a dose of 50 mg subcutaneously once a week. Breastmilk samples were collected over a 2-month period. Before the first dose, the milk level was <1.5 mcg/L. Etanercept milk levels 24 and 48 hours after 25 mg doses were 4.48 and 5.25 mcg/L, respectively. Etanercept milk levels 24 and 72 hours after 50 mg doses were 4.48 and 7.5 mcg/L.[12]

Six women who were receiving etanercept 50 mg per week donated milk samples to a human milk repository. Samples were taken between 5.14 hours (range 1.5 to 10.5 hours) after the last milk expression The median milk etanercept concentration was 12.9 ng/mL (IRQ 6.0 to 46.9 ng/mL). The level in milk was correlated with both the infant and maternal age, but not with any other variable. The estimated average RID was 1.9% with an upper 95% CI of 7.0%.[13]

Infant Levels. An infant was born to a mother who received etanercept 25 mg subcutaneously twice a week during pregnancy and postpartum. At birth, the cord blood etanercept concentration was 81 mcg/L. The infant was completely breastfed. At 1 week postpartum, the infant's serum etanercept level was 21 mcg/L, at 3 weeks postpartum it was 2 mcg/L, and at 12 weeks it was undetectable, despite a breastmilk concentration of 3.5 mcg/L at that time.[10]

An infant was born to a mother with ankylosing spondylitis who received etanercept 25 mg subcutaneously once weekly during pregnancy and postpartum. The infant was fed about 50% breastmilk during days 40 to 47 postpartum following a maternal dose on day 40. Infant serum etanercept concentrations were 40 mcg/L at birth and <4 mcg/L on days 41 to 43.[12]

### Effects in Breastfed Infants

A woman with rheumatoid arthritis began etanercept 25 mg subcutaneously twice a week at 3 months postpartum and later switched to a dose of 50 mg subcutaneously once a week. Her infant was breastfed (extent not stated) until 6 months of age. The infant was reportedly healthy at 3 years of age.[12]

A case-control study of women with chronic arthritic conditions found 5 women who received etanercept during pregnancy and lactation (extent not stated). No differences were observed in the 5 infants' growth parameters, developmental milestones, vaccinations and diseases in the first year of life compared to those not exposed to the drugs with lactation.[14]

Six infants were breastfed (2 fully, 4 partially) by mothers with rheumatoid arthritis or ankylosing spondylitis who were receiving etanercept during pregnancy and up to the time they were enrolled in the study. One mother reported a nonserious rash and high-pitched crying in her infant, both of which resolved without intervention. All infants had growth measures within normal range at their 6-month well-child visit.[13]

A national prospective registry of patients with rheumatic diseases who were treated with biological DMARDs was conducted in Spain. Three infants whose mothers were taking etanercept were breastfed (extent not stated) with no mild or severe adverse events reported in the infants.[15]

A woman with ankylosing spondylitis was breastfeeding her infant when subcutaneous etanercept 25 mg weekly was begun at 11 weeks postpartum because of increased disease activity. Her infant developed somnolence, prolonged sleep, feeding difficulty, and hypotonia the day after the first dose. These neurologic symptoms persisted, with some fluctuation in intensity, over the following weeks. About 1 week after their onset, the infant also began to experience intermittent low-grade fever, cough, and nasal congestion. Etanercept was then discontinued. Approximately 4 weeks after the onset of the initial symptoms, the infant developed intermittent fever, cough, diarrhea, and nasal congestion worsened. The infant was diagnosed with an infection and was successfully treated with azithromycin. The initial symptoms of excessive drowsiness, feeding difficulty, and hypotonia were possibly caused by etanercept, but diagnosis was complicated by the respiratory infection in the infant. The mother stopped breastfeeding at 5 months of age and at 9 months, the infant had not experienced any additional health problems.[16]

### Effects on Lactation and Breastmilk

An analysis of the US Food and Drug Administration’s FAERS database of 7,022 spontaneous adverse reaction reports of anti-TNF drugs found that they may cause an increased risk of lactation insufficiency and disorders. Drugs that were studied included adalimumab, infliximab, golimumab, certolizumab, and etanercept. The authors noted that TNF alpha is involved in milk production, adding biological plausibility to the findings.[17]

### Alternate Drugs to Consider

(Psoriasis) Adalimumab, Certolizumab Pegol, Infliximab, Phototherapy, Tretinoin; (Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Infliximab, Tocilizumab

### References

1 Østensen M, Eigenmann GO. Etanercept in breast milk. J Rheumatol 2004;31:1017.15124283
2 Mahadevan U, Robinson C, Bernasko N, et al. Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508–24.30658060
3 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
4 Yeung J, Gooderham MJ, Grewal P, et al. Management of plaque psoriasis with biologic therapies in women of child-bearing potential consensus paper. J Cutan Med Surg 2020;24 (1_Suppl):3S–14S.32500730
5 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
6 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1–27.36005814
7 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
8 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
9 Sepiashvili L, Brydon A, Koroshegyi C, et al. Reduction of tumor necrosis factor (TNF) in milk of women receiving anti-TNF antibody. Pediatr Res 2025;97:1935–42.39487320
10 Murashima A, Watanabe N, Ozawa N, et al. Etanercept during pregnancy and lactation in a patient with rheumatoid arthritis: Drug levels in maternal serum, cord blood, breast milk and the infant's serum. Ann Rheum Dis 2009;68:1793–4.19822717
11 Berthelsen BG, Fjeldsoe-Nielsen H, Nielsen CT, et al. Etanercept concentrations in maternal serum, umbilical cord serum, breast milk and child serum during breastfeeding. Rheumatology (Oxford) 2010;49:2225–7.20581374
12 Keeling S, Wolbink GJ. Measuring multiple etanercept levels in the breast milk of a nursing mother with rheumatoid arthritis. J Rheumatol 2010;37:1551.20595298
13 Bertrand K, Rossi S, Wells A, et al. The concentration of etanercept in human milk and infant outcomes. J Rheumatol 2023;50:712–4.36379569
14 Dall'ara F, Reggia R, Bazzani C, et al. Safety of anti-TNF alfa agents during pregancy and breastfeeding: longterm follow up of exposed children in a case-series of mothers with chronic arthritides. Ann Rheum Dis 2016;75 (Suppl 2):493. doi:10.1136/annrheumdis-2016-eular.4123
15 Membrive-Jiménez C, Sánchez-Piedra C, Martínez-González O, et al. Safety and effectiveness of bDMARDs during pregnancy in patients with rheumatic diseases: Real-world data from the BIOBADASER registry. Reumatol Clin (Engl Ed) 2023;19:500–6.37945183
16 Eskiyurt B, Horoz E, Bakırlı DC, et al. Possible association between etanercept use during breastfeeding and infant somnolence, hypotonia, and feeding difficulties: A case report and literature review. Breastfeed Med 2026;21:336–40.42093128
17 Yan Z, Chen H, Sun J, et al. Divergent safety profiles of TNF inhibitors in pregnancy: A comprehensive pharmacovigilance analysis of the FAERS database. J Autoimmun 2026;160:103553.41932089

## Substance Identification

### Substance Name

Etanercept

### CAS Registry Number

185243-69-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents

Dermatologic Agents

Gastrointestinal Agents

Tumor Necrosis Factor Inhibitors